# Pulsatilla

## Drug Levels and Effects

### Summary of Use during Lactation

Pulsatilla (Anemone pulsatilla and other related species) contains ranunculin, protoanemonin, and anemonin as well as triterpene saponins and flavonoids. The fresh plant is extremely irritating to the skin, gastrointestinal tract and mucous membranes. Allergic reactions have been reported to pulsatilla. Homeopathic preparations of pulsatilla are reportedly used for sore nipples and mastitis,[1] to reduce an overabundant milk supply,[2] or to increase milk supply.[3] No scientifically valid clinical trials support any of these uses. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[4,5] Because of a lack of information, other agents may be preferred in nursing mothers.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Castro M. Homeopathy. A theoretical framework and clinical application. J Nurse Midwifery 1999;44:280-90.10380446
2 Eglash A. Treatment of maternal hypergalactia. Breastfeed Med 2014;9:423-5.25361472
3 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317-8.22224508
4 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
5 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531

## Substance Identification

### Substance Name

Pulsatilla

### Scientific Name

Anemone pulsatilla

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal